# Laronidase

CASRN: 210589-09-6

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information from on mother receiving laronidase for mucopolysaccharidosis type I indicates that the drug is not detectable in breastmilk and her breastfed infant suffered no adverse reactions or adverse developmental effects from the drug in milk. The lack of penetration into milk is consistent with its high molecular weight of 82,000 Da. If laronidase is required by the mother, it is not a reason to discontinue breastfeeding. Until more data are available, laronidase should be used with careful monitoring during breastfeeding.

### Drug Levels

Maternal Levels. A woman with mucopolysaccharidosis type I received intravenous laronidase 100 units/kg weekly during breastfeeding, beginning one week after delivery. Laronidase was undetectable (assay limits not specified) in breastmilk just before the infusion and 60 minutes after the infusion at 1 and 3 months postpartum.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with mucopolysaccharidosis type I received intravenous laronidase 100 units/kg weekly for 28 doses during her 37-week pregnancy. She resumed therapy one week after delivery and breastfed her infant for 3 months. The infant had normal height and weight up to 12 months of age and showed normal development at 2.5 years of age. No adverse drug reactions were reported in the infant.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Castorina M, Antuzzi D, Richards SM, et al. Successful pregnancy and breastfeeding in a woman with mucopolysaccharidosis type I while receiving laronidase enzyme replacement. therapy. Clin Exp Obstet Gynecol 2015;42:108-13 25864295

## Substance Identification

### Substance Name

Laronidase

### CAS Registry Number

210589-09-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes

Enzyme Replacement Therapy

Hexosaminidases

Chondroitinsulfatases